# Cyclamate

CASRN: 100-88-9

## Drug Levels and Effects

### Summary of Use during Lactation

Very little cyclamate enters breastmilk after maternal ingestion. However, some authors suggest that women may wish to limit the consumption of nonnutritive sweeteners while breastfeeding because their effect on the nursing infants are unknown.[1,2]

### Drug Levels

Maternal Levels. Forty-nine women consumed a beverage containing 60 mg of cyclamate. Normal and overweight women were about equally represented in the sample. Breastmilk samples were collected before the beverage and at 30, 60, 120, 180, 240, 300, and 360 minutes after the beverage. The average peak milk concentration was 2.56 mcg/L an occurred at 5 hours after the beverage.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspartame

### References

1 Sylvetsky AC, Gardner AL, Bauman V, et al. (2015). Nonnutritive sweeteners in breast milk. J Toxicol Environ Health A.
2 Rother KI, Sylvetsky AC, Schiffman SS. (2015). Non-nutritive sweeteners in breast milk: Perspective on potential implications of recent findings. Arch Toxicol.
3 Stampe S, Leth-Møller M, Greibe E, et al. (2022). Artificial sweeteners in breast milk: A clinical investigation with a kinetic perspective. Nutrients.

## Substance Identification

### Substance Name

Cyclamate

### CAS Registry Number

100-88-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Artificial Sweeteners

Sweetening Agents